# Mirdametinib

CASRN: 391210-10-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of mirdametinib during breastfeeding. Because mirdametinib is over 99% bound to plasma proteins, the amount in milk is likely to be low. However, because of its potential toxicity in the breastfed, the manufacturer recommends that breastfeeding be discontinued during mirdametinib therapy and for 1 week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Mirdametinib

### CAS Registry Number

391210-10-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

MEK inhibitors